# Quniupristin-Dalfopristin

CASRN: 126602-89-9

## Drug Levels and Effects

### Summary of Use during Lactation

Quinupristin and dalfopristin are relatively large molecules that are unlikely to be excreted into breastmilk in large amounts or to be absorbed orally by the breastfeeding infant.[1] However, since no information is available on the use of quinupristin and dalfopristin during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Clindamycin, Doxycycline, Linezolid, Trimethoprim-Sulfamethoxazole,Vancomycin

### References

1 Chin KG, Mactal-Haaf C, McPherson CE. (2000). Use of anti-infective agents during lactation: Part 1 -- beta-lactam antibiotics, vancomycin, quinupristin-dalfopristin, and linezolid. J Hum Lact.

## Substance Identification

### Substance Name

Quniupristin-Dalfopristin

### CAS Registry Number

126602-89-9

### Drug Class

Breast Feeding

Lactation

Anti-Bacterial Agents

Anti-Infective Agents

Protein Synthesis Inhibitors